# Bempedoic Acid

CASRN: 738606-46-7

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of bempedoic acid and its active metabolite are very low, but there is no published experience with bempedoic acid during breastfeeding. If a mother requires bempedoic acid, it is not a reason to discontinue breastfeeding. An alternate drug might be considered while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. The manufacturer reports a study in which bempedoic acid 180 mg was given orally once daily for six consecutive days to 8 healthy lactating women. The estimated geometric mean bempedoic acid peak concentration in breastmilk was 118 mcg/L (range 79.6 to 251 mcg/L), occurring at a median of about 3 hours. The mean daily infant dose of bempedoic acid through breastmilk was approximately 0.03 mg/day (95% CI: 0.02; 0.05) or 0.012 mg/kg daily. The mean RID was approximately 0.5% of the maternal weight-adjusted dosage. Concentrations of ESP15228, the active metabolite, in milk were below the limit of quantitation (<20 mcg/L) in 7 of 8 subjects.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cholestyramine, Colesevelam, Colestipol

### References

1 Esperion Therapeutics Inc. Milk-only lactation study to evaluate the concentration of bempedoic acid and bempedoic acid/ezetimibe fixed combination drug product (FCDP) in the breast milk of healthy lactating women. 2025. https://clinicaltrials.gov/study/NCT06021951?tab=history&a=3#version-content-panel

## Substance Identification

### Substance Name

Bempedoic acid

### CAS Registry Number

738606-46-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents

Enzyme Inhibitors